# Dienogest

CASRN: 65928-58-7

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the use of dienogest during breastfeeding. Dienogest is only available in the United States in a combination oral contraceptive product that also contains estradiol valerate. Based on the available evidence, expert opinion holds that progestin-only contraceptives are preferred over combined oral contraceptives in breastfeeding women, especially during the first 4 weeks postpartum.[1] For further information, consult the record entitled, Contraceptives, Oral, Combined.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Etonogestrel, Intrauterine Copper Contraceptive, Oral Levonorgestrel, Intrauterine Levonorgestrel, Levonorgestrel Implant, Medroxyprogesterone Acetate, Norethindrone, Progesterone

### References

1 World Health Organization. Medical Eligibility Criteria For Contraceptive Use: Sixth Ed. 2025. https://www.who.int/publications/i/item/9789240115583

## Substance Identification

### Substance Name

Dienogest

### CAS Registry Number

65928-58-7

### Drug Class

Breast Feeding

Lactation

Milk, Human

Contraceptive Agents, Female

Contraceptives, Oral, Synthetic